# Hexaminolevulinate

CASRN: 140898-97-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of hexaminolevulinate during breastfeeding. After instillation into the bladder, only about 7% of a dose is absorbed into the maternal bloodstream, so the amount of drug excreted into milk is expected to be minimal. Until more data become available, hexaminolevulinate should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Hexaminolevulinate

### CAS Registry Number

140898-97-1

### Drug Class

- Breast Feeding
- Lactation
- Diagnostic Agents
- Photosensitizing Agents